# Benznidazole

CASRN: 22994-85-0

## Drug Levels and Effects

### Summary of Use during Lactation

Benznidazole is excreted into milk in dosages much lower than the treatment dosage for infants. Because of the low levels of benznidazole in breastmilk and safety when given directly to infants, its use is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Seventeen breastmilk samples were obtained at unspecified times from 10 women being treated for Chagas disease with benznidazole 5 to 10 mg/kg daily. Breastmilk concentration varied between undetectable (<0.3 mg/L) and 9.8 mg/L, with a mean of 4.1 mg/L.[1] A fully breastfed infant would receive a daily dosage of 0.6 mg/kg daily using the mean breastmilk level and 1.5 mg/kg daily using the maximum value. These values are much less than the therapeutic dosage of 5 mg/kg daily that has been used safely in newborn infants with congenital Chagas disease.[2,3]

Ten women with chronic Chagas disease received benznidazole in an oral dose of 300 or 400 mg (median 5.65 mg/kg) twice daily for 30 days. Sixteen breastmilk samples were obtained at a median of 9 days (range 6 to 34 days) of therapy. The median breastmilk benznidazole level was 3.8 mg/L (range 0.3 to 5.9 mg/L). The median calculated infant dosage was 0.65 mg/kg daily, which is about 10% of the dose used to treat infants for Chagas disease. This dosage translated to 12.3% (range 1.3 to 17.0%) of the maternal weight-adjusted daily dosage.[4]

Four women with Chagas disease were treated with benznidazole 5 to 10 mg/kg daily in 2 divided doses provided breastmilk samples for analysis after 4 to 10 days of therapy. The timing of the sample with respect to doses was not reported. Breastmilk concentrations of benznidazole ranged from nonquantifiable (<0.88 mg/L) to 7.1 mg/L.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Ten women with chronic Chagas disease received benznidazole in a median oral dose of 5.65 mg/kg twice daily for 30 days. Median infant age Ten women with chronic Chagas disease received benznidazole in a median oral dose of 5.65 mg/kg twice daily for 30 days. Median infant age was 5.2 months (range 20 days-13 months). Five children were exclusively breastfed and the others partially breastfed. None of the infants had any adverse reactions attributable to benznidazole.[4]

A postpartum woman diagnosed with Chagas disease was treated with benznidazole 5 mg/kg daily beginning one month postpartum and continuing for 30 days. She continued to breastfeed (extent not stated) her infant. The authors reported that no adverse effects were seen in the infant.[6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Marson M, Padro J, Reta M, et al. A simple and efficient HPLC method for benznidazole dosage in human breast milk. Ther Drug Monit 2013;35:522-6.23851912
2 Drago B, Kimura D, Rovnaghi C, et al. Double-blind, placebo-controlled pilot randomized trial of methylprednisolone infusion in pediatric acute respiratory distress syndrome. Pediatr Crit Care Med 2015;16:e74-81.25634565
3 Chippaux J, Salas-Clavijo A, Postigo J, et al. Evaluation of compliance to congenital Chagas disease treatment: Results of a randomised trial in Bolivia. Trans R Soc Trop Med Hyg 2013;107:1-7.23296694
4 García-Bournissen F, Moroni S, Marson M, et al. Limited infant exposure to benznidazole through breast milk during maternal treatment for Chagas disease. Arch Dis Child 2015;100:90-4.25210104
5 Padró J, Pellegrino V, RB, Echevarria R, et al. Development of an ionic-liquid-based dispersive liquid-liquid microextraction method for the determination of antichagasic drugs in human breast milk: Optimization by central composite design. J Sep Sci 2015;38:1591-600.25711461
6 Vela-Bahena L, Vergara R, Vite L, et al. Postpartum treatment without interrupting breastfeeding in a patient with Chagas disease. Ginecol Obstet Mex 2015;83:487-93.26591033

## Substance Identification

### Substance Name

Benznidazole

### CAS Registry Number

22994-85-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiparasitic Agents

Antiprotozoal Agents

Nitroimidazoles

Trypanocidal Agents